# Coal Tar

CASRN: 8007-45-2

## Drug Levels and Effects

### Summary of Use during Lactation

Coal tar applied topically to maternal skin can result in pyrene absorption by the infant, probably by skin-to-skin or skin-to-mouth contact with the mother. Because of the potential toxicity of coal tar to the breastfed infant, alternate drugs are preferred.[1] If a coal tar product is used, it would be prudent to treat the smallest area of skin possible. It is particularly important to ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated.

### Drug Levels

Maternal Levels. A woman was treated with topical coal tar-containing medications for the treatment of atopic dermatitis. They were applied to the entire body except for the breasts and face. Treatment was started when the infant was 3 months old and continued for 50 days. Breastmilk was analyzed before treatment and on 11 occasions during therapy. Pyrene and benzo[a]pyrene were undetectable (<0.0035 and 0.056 micromol/L, respectively). The pyrene metabolite, 1-hydroxypyrene, was detected in trace amounts in 3 of the 11 samples.[2]

Infant Levels. A woman was treated with topical coal tar-containing medications for the treatment of atopic dermatitis. They were applied to the entire body except for the breasts and face. Treatment was started when the infant was 3 months old and continued for 50 days. The mother breastfed her infant (extent not stated) and the infant's urine was collected before the start of treatment and 4 times during maternal therapy with coal tar. The pyrene metabolite, 1-hydroxypyrene, was detected in all of the infant's urine samples. The baseline (pretreatment) concentration was 1.63 micromol/mol of creatinine. Subsequent (during maternal treatment) urine concentrations were 9.96, 97.1, 8.67 and 11.3 micromol/mol of creatinine. Since the mother's breastmilk contained no detectable pyrene or benzo[a]pyrene and only low levels of 1-hydroxypyrene, the authors postulated that the infant obtained the pyrene via skin-to-skin or skin-to-mouth contact with the mother and metabolized it to 1-hydroxypyrene.[2]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Psoriasis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab, Phototherapy, Tretinoin

### References

1 Yaghi M, McMullan P, Truong TM, et al. Safety of dermatologic medications in pregnancy and lactation: An Update - Part II: Lactation. J Am Acad Dermatol 2024;91:651-68.38280680
2 Scheepers PT, van Houtum JL, Anzion RB, et al. Uptake of pyrene in a breast-fed child of a mother treated with coal tar. Pediatr Dermatol 2009;26:184-7.19419468

## Substance Identification

### Substance Name

Coal Tar

### CAS Registry Number

8007-45-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Keratolytic Agents